# Zuranolone

CASRN: 1632051-40-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low amounts of zuranolone in milk, it would not be expected to cause any adverse effects in breastfed infants. If zuranolone is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, zuranolone should be used with careful infant monitoring for excessive sedation during breastfeeding, especially with higher dosages and in newborn and preterm infants.

### Drug Levels

Maternal Levels. A manufacturer-sponsored study was conducted in 14 healthy lactating women who were 12 or more weeks postpartum and treated with oral administration of 30 mg of zuranolone daily at home for 14 days. On day 5 of treatment, they came to the study site where they received their 8 pm dose after a fat-containing meal. Participants collected milk samples at variable times over 11 days after the start of therapy. Milk concentration values were used along with blood samples from day 5 in a population pharmacokinetic model (NONMEM) to simulate the mean breastmilk levels in 1000 female patients. The daily infant dose via milk was estimated to be 0.00125 mg/kg on day 5 of therapy, resulting in a mean weight-adjusted relative infant dose of 0.74% using the standard of 150 mL/kg of milk per day.[1] Product information further states that the concentrations of zuranolone in breastmilk were below the level of quantification limit by 4 to 6 days after the last dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with bipolar II depression and obsessive-compulsive disorder was taking lamotrigine 400 mg, sertraline 200 mg, and adjunctive risperidone 2 mg daily. She developed postpartum depression after the birth of her child. She began zuranolone 50 mg daily and continued nursing (presumably partial) with no sedation of herself or the infant. The authors report having used it in the mothers of 25 infants without any infant side effects.[2]

### Effects on Lactation and Breastmilk

In a manufacturer-sponsored study, 14 healthy lactating women who were 12 or more weeks postpartum and treated with oral administration of 30 mg of zuranolone daily for 14 days collected milk samples from 3 days before to day 5 of treatment. There was a mean decrease of 41.2 mL or 8.3% in milk volume collected over days 3 to 5 of treatment compared with pretreatment baseline.[1] However, this decrease could be an artifact of the study design, because participants were told to stop breastfeeding and pump their milk during the study. Other factors could have been at play, also.

### Alternate Drugs to Consider

Brexanolone, Nortriptyline, Paroxetine, Sertraline

### References

1 Deligiannidis KM, Bullock A, Nandy I, et al. Zuranolone concentrations in the breast milk of healthy, lactating individuals: Results from a phase 1 open-label study. J Clin Psychopharmacol 2024;44:337–44.38739007
2 Price MZ, Price RL. Zuranolone for postpartum depression in real-world clinical practice. J Clin Psychiatry 2025;86:25cr15876.

## Substance Identification

### Substance Name

Zuranolone

### CAS Registry Number

1632051-40-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressants

Antidepressive Agents

GABA Agents

Hormones

Progesterone Congeners